# Vitamin E

CASRN: 59-02-9

## Drug Levels and Effects

### Summary of Use during Lactation

Vitamin E is a normal component of human milk. Maternal obesity, smoking and possibly preterm birth (<37 weeks gestational age) are associated with lower milk vitamin E levels. Lactating mothers may need to supplement their dietary intake of vitamin E to achieve the recommended daily intake of 19 mg.[1] Daily maternal vitamin E supplementation from prenatal multivitamins can safely and modestly increase milk vitamin E levels and improve the vitamin E status of the breastfed infant compared to no supplementation. Higher daily dosages have not been studied.

### Drug Levels

Alpha-tocopherol is the major isoform of vitamin E present in the human diet and in breastmilk.[1,2] Levels are highest in colostrum and decrease postnatally.[3] Higher alpha-tocopherol milk levels result in greater milk antioxidant capacity.[2,4,5] Maternal serum levels correlate with breastmilk levels during the early postpartum period, but this relationship has not been studied in mature milk.[6,7] Vitamin E is naturally found in plant seed oils, and women with higher intakes of polyunsaturated fatty acids during lactation have higher alpha-tocopherol in breastmilk.[8] A serum alpha-tocopherol concentration <12 micromoles/L indicates vitamin E deficiency in adults and children.

United States Food and Drug Administration standards for dietary supplement labeling recommend mcg rather than the traditional “international units” (IU) when describing vitamin E doses. One IU = 0.67 mg = 1.556 micromoles (0.43 mg per micromole) of the naturally occurring stereoisomer d-alpha-tocopherol, also known as RRR-alpha-tocopherol. Some vitamin E supplements and food fortifiers are manufactured using the synthetic racemic dl-alpha-tocopherol form where 1 IU = 0.45 mg.[1]

Maternal Levels. In mothers not taking a vitamin E supplement, average alpha-tocopherol levels reported in colostrum range from 20 to 50 micromoles/L. At 1 to 2 weeks postpartum, milk levels are 7 to 14 micromoles/L, and beyond 2 weeks they are 3 to 9 micromoles/L.[3,9] Hindmilk levels are higher than foremilk.[10] Maternal obesity and smoking are associated with lower milk alpha-tocopherol levels.[11,12] Preterm birth (< 37 weeks gestational age) may also be associated with lower milk levels.[10] In some comparative studies, reported levels range from 1/3 to 2/3 lower in preterm than term milk.[11,12] Others have not found a difference associated with prematurity.[13,14]

In a series of prospective studies conducted by the same research group in Brazil, a single supplemental dose of vitamin E given to mothers in the first 48 hours postpartum produced small to modest short-term increases in colostrum and milk levels compared to no supplementation. The best results came from 400 IU (268 mg) of natural vitamin E which increased colostrum levels by nearly 60%, from about 35 micromoles/L at baseline to 50 micromoles/L at 24 hours after the dose compared to a 36% increase from the same dose of synthetic vitamin E.[15] By 7 days after the dose, mothers who received 400 IU (268 mg) of natural vitamin E had milk levels return to baseline, although still significantly higher than milk of unsupplemented mothers whose levels were below baseline. By 30 days, both groups had similar milk levels, which were about one-third of baseline levels.[16] A single 110 IU (50 mg) dose of synthetic vitamin E did not significantly change colostrum levels 24 hours after the dose.[17]

In Tanzania, 320 women with vitamin E deficiency (serum vitamin E levels of approximately 10 micromoles/L) were given a daily multivitamin containing 30 mg of natural vitamin E during pregnancy and postpartum. Their average milk levels of alpha-tocopherol at 3, 6 and 12 months postpartum were significantly higher (12.5, 11.5 and 10.3 micromoles/L, respectively) than in 306 women not given the multivitamin (10.3, 8.8, and 8.4 micromoles/L).[18]

Infant Levels. The average serum level observed in healthy children is 20 micromoles/L.[19]

In 306 HIV positive Tanzanian women who were given a daily multivitamin containing 30 mg daily of natural vitamin E starting at 12 to 27 weeks of pregnancy and continuing postpartum, the average serum alpha-tocopherol levels in their exclusively breastfed infants were significantly higher (17 and 15.7 micromoles/L, respectively) at 6 weeks and 6 months postpartum compared to 288 women not given the multivitamin (15.2 and 14.6 micromoles/L, respectively). All the women studied had similar serum vitamin E levels of approximately 23 micromoles/L at baseline. The contribution of breastmilk to the higher infant vitamin E levels cannot be determined.[20]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 National Institutes of Health Office of Dietary Supplements. Vitamin E fact sheet for health professionals. 2016. https://ods.od.nih.gov/factsheets/VitaminE-HealthProfessional/
2 Elisia I, Kitts DD. Quantification of hexanal as an index of lipid oxidation in human milk and association with antioxidant components. J Clin Biochem Nutr 2011;49:147-52.22128211
3 Xi Y, Wang X, Liu K, et al. Vitamin E concentration in breast milk in different periods of lactation: Meta-analysis. Front Nutr 2022;9:1050011.36438759
4 Tijerina-Sáenz A, Innis SM, Kitts DD. Antioxidant capacity of human milk and its association with vitamins A and E and fatty acid composition. Acta Paediatr 2009;98:1793-8.19807706
5 Quiles JL, Ochoa JJ, Ramírez-Tortosa MC, et al. Coenzyme Q concentration and total antioxidant capacity of human milk at different stages of lactation in mothers of preterm and full-term infants. Free Radic Res 2006;40:199-206.16390829
6 Fares S, Sethom MM, Kacem S, et al. Retinol and alpha-tocopherol in the colostrum of lactating Tunisian women delivering prematurely: Associations with maternal characteristics. Pediatr Neonatol 2016;57:120-6.26293321
7 Lou Z, Dang G, Wu S, et al. The natural occurring RRR-α-tocopherol and synthetic α-tocopherol stereoisomers in maternal plasma, cord plasma and breast milk among six regions of China. Br J Nutr 2023;130:878-86.35757962
8 da Mata AMB, da Silva AGCL, Medeiros JFP, et al. Dietary lipid intake influences the alpha-tocopherol levels in human milk. J Pediatr Gastroenterol Nutr 2020;70:858-63.32443047
9 Silva ALCD, Ribeiro KDDS, Melo LRM, et al. Vitamin E in human milk and its relation to the nutritional requirement of the term newborn. Rev Paul Pediatr 2017;35:158-64.28977333
10 Bishara R, Dunn MS, Merko SE, et al. Nutrient composition of hindmilk produced by mothers of very low birth weight infants born at less than 28 weeks' gestation. J Hum Lact 2008;24:159-67.18436967
11 Sámano R, Martínez-Rojano H, Hernández RM, et al. Retinol and alpha-tocopherol in the breast milk of women after a high-risk pregnancy. Nutrients 2017;9:E14.28045436
12 Ortega RM, López-Sobaler AM, Martínez RM, et al. Influence of smoking on vitamin E status during the third trimester of pregnancy and on breast-milk tocopherol concentrations in Spanish women. Am J Clin Nutr 1998;68:662-7.9734745
13 Haug M, Laubach C, Burke M, et al. Vitamin E in human milk from mothers of preterm and term infants. J Pediatr Gastroenterol Nutr 1987;6:605-9.3430268
14 Grilo EC, Lira LQ, Dimenstein R, et al. Influence of prematurity and birth weight on the concentration of alpha-tocopherol in colostrum milk. Rev Paul Pediatr 2013;31:473-9.24473952
15 Clemente HA, Ramalho HM, Lima MS, et al. Maternal supplementation with natural or synthetic vitamin E and its levels in human colostrum. J Pediatr Gastroenterol Nutr 2015;60:533-7.25419678
16 Pires Medeiros JF, Ribeiro KD, Lima MS, et al. alpha-Tocopherol in breast milk of women with preterm delivery after a single postpartum oral dose of vitamin E. Br J Nutr 2016;115:1424-30.26931347
17 Dimenstein R, Lira L, Medeiros AC, et al. [Effect of vitamin E supplementation on alpha-tocopherol levels in human colostrum]. Rev Panam Salud Publica 2011;29:399-403.21829962
18 Webb AL, Aboud S, Furtado J, et al. Effect of vitamin supplementation on breast milk concentrations of retinol, carotenoids and tocopherols in HIV-infected Tanzanian women. Eur J Clin Nutr 2009;63:332-9.17940544
19 Traber MG. Vitamin E inadequacy in humans: Causes and consequences. Adv Nutr 2014;5:503-14.25469382
20 Baylin A, Villamor E, Rifai N, et al. Effect of vitamin supplementation to HIV-infected pregnant women on the micronutrient status of their infants. Eur J Clin Nutr 2005;59:960-8.15956998

## Substance Identification

### Substance Name

Vitamin E

### CAS Registry Number

59-02-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vitamins

Antioxidants